# Diethyltoluamide

CASRN: 134-62-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of diethyltoluamide (DEET) during breastfeeding. However, the Centers for Disease Control and Prevention and U.S. Environmental Protection Agency consider DEET to be safe and effective during breastfeeding when used as directed.[1] It should be used by breastfeeding women to avoid exposure to mosquito-borne viruses.[1-3] Avoid application directly to the nipple and other areas where the infant might directly ingest the product.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Centers for Disease Control and Prevention. Avoid bug bites. Accessed 5/20/2021. http://wwwnc.cdc.gov/travel/page/avoid-bug-bites#repellent
2 Koren G, Matsui D, Bailey B. (2003). DEET-based insect repellants: safety implications for children and pregnant and lactating women. CMAJ.
3 Sudakin DL, Trevathan WR. (2003). DEET: A review and update of safety and risk in the general population. J Toxicol Clin Toxicol.

## Substance Identification

### Substance Name

Diethyltoluamide

### CAS Registry Number

134-62-3

### Drug Class

Breast Feeding

Lactation

Insect Repellents